# Baricitinib

CASRN: 1187594-09-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of baricitinib during breastfeeding. Expert opinion recommends that mothers not breastfeed while taking baricitinib.[1] An alternate drug is preferred, especially while nursing a newborn or preterm infant. The manufacturer recommends that women avoid nursing during therapy and for 4 days after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Tocilizumab

### References

1 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311

## Substance Identification

### Substance Name

Baricitinib

### CAS Registry Number

1187594-09-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents

Enzyme Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors

Signal Transduction Inhibitors

Protein Kinase Inhibitors